# Cidofovir

CASRN: 149394-66-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of cidofovir during breastfeeding. Until more safety data become available, an alternate drug is preferred. Individuals with smallpox are recommended to not breastfeed their infant because of the risk of passing variola virus to the infant through direct contact. Providing pumped milk to the infant may be possible if no lesions are near the breast and adequate precautions are taken with respect to cleaning hands, breasts, breast pumps and any other apparatuses used to provide milk to the infant. Individuals with Mpox should feed their infants with pasteurized donor milk or infant formula until all of their lesions are healed. Numerous other safety precautions are advised for mothers with Mpox.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Mpox) Tecovirimat

## Substance Identification

### Substance Name

Cidofovir

### CAS Registry Number

149394-66-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents